# Borage

CASRN: 84012-16-8

## Drug Levels and Effects

### Summary of Use during Lactation

Borage (Borago officinalis) is available as plant parts such as the leaf and flower and borage seed oil. Borage plant parts contain pyrrolizidine alkaloids that are toxic to the liver and lungs and possibly carcinogenic. These alkaloids might be excreted into breastmilk.[1] Borage plant parts have been used as a mild diuretic, expectorant, to induce sweating, and in proprietary mixtures promoted to increase milk supply;[2,3] however, no scientifically valid clinical trials support this use. Galactogogues should never replace evaluation and counseling on modifiable factors that affect milk production.[4,5] Products containing other plant parts such as leaves should be avoided.[3]

Borage seed oil contains high concentrations of gamma-linolenic acid, an omega-6 fatty acid, and possibly small amounts of pyrrolizidine alkaloids. Supplementation of nursing mothers with borage seed oil increases the breastmilk content of gamma-linolenic acid and dihomo-gamma-linoleic acid, but not arachidonic acid. Borage seed oil is generally well tolerated in adults; however, only products certified as pyrrolizidine alkaloid free should be used. Heating breastmilk to 63.5 degrees C reduces the concentration of linolenic acid by about 22%. Freezing milk at -20 degrees C and thawing more than once decreases linolenic acid concentration by an average of 63%.[6]

Dietary supplements do not require extensive pre-marketing approval from the U.S. Food and Drug Administration. Manufacturers are responsible to ensure the safety, but do not need to prove the safety and effectiveness of dietary supplements before they are marketed. Dietary supplements may contain multiple ingredients, and differences are often found between labeled and actual ingredients or their amounts. A manufacturer may contract with an independent organization to verify the quality of a product or its ingredients, but that does not certify the safety or effectiveness of a product. Because of the above issues, clinical testing results on one product may not be applicable to other products. More detailed information about dietary supplements is available elsewhere on the LactMed Web site.

### Drug Levels

Maternal Levels. Forty nursing mothers averaging 5 weeks postpartum were randomized to receive borage seed oil capsules containing either 230 or 460 mg of gamma-linolenic acid (GLA) daily in 4 divided doses for 1 week. Half of the women in each group were considered to be atopic and had lower initial levels of arachidonic acid (AA) and dihomo-gamma-linoleic acid (DGLA) in their breastmilk. In the low-dose group of atopic mothers, GLA levels increased from 0.11% by weight to 0.16%. In the high-dose group of atopic mothers, GLA levels increased from 0.09% to 0.18%. DGLA also increased from 0.41% to 0.53% in the low-dose group and from 0.36% to 0.51% in the high-dose group. AA levels were not affected by supplementation.[7]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Panter KE, James LF. (1990). Natural plant toxicants in milk: A review. J Anim Sci.
2 Howard CR, Lawrence RA. (1999). Drugs and breastfeeding. Clin Perinatol.
3 Low Dog T. (2009). The use of botanicals during pregnancy and lactation. Altern Ther Health Med.
4 Brodribb W. ABM Clinical Protocol #9. (2018). Use of galactogogues in initiating or augmenting maternal milk production, second revision 2018. Breastfeed Med.
5 (2021). Breastfeeding challenges: ACOG Committee Opinion, Number 820. Obstet Gynecol.
6 Wardell JM, Hill CM, D'Souza SW. (1981). Effect of pasteurization and of freezing and thawing human milk on its triglyceride content. Acta Paediatr Scand.
7 Thijs C, Houwelingen A, Poorterman I, et al. (2000). Essential fatty acids in breast milk of atopic mothers: comparison with non-atopic mothers, and effect of borage oil supplementation. Eur J Clin Nutr.

## Substance Identification

### Substance Name

Borage

### Scientific Name

Borago officinalis

### CAS Registry Number

84012-16-8

### Drug Class

Breast Feeding

Lactation

Complementary Therapies

Galactogogues

Phytotherapy

Plants, Medicinal